# Leflunomide

CASRN: 75706-12-6

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of leflunomide during breastfeeding, so an alternate drug is preferred, especially while nursing a newborn or preterm infant[1-3]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Rheumatoid Arthritis) Auranofin, Gold Sodium Thiomalate, Hydroxychloroquine, Infliximab, Methotrexate, Penicillamine, Sulfasalazine

### References

1 Flint J, Panchal S, Hurrell A, et al. (2016). BSR and BHPR guideline on prescribing drugs in pregnancy and breastfeeding-Part I: Standard and biologic disease modifying anti-rheumatic drugs and corticosteroids. Rheumatology (Oxford).
2 Sammaritano LR, Bermas BL, Chakravarty EE, et al. (2020). 2020 American College of Rheumatology Guideline for the Management of Reproductive Health in Rheumatic and Musculoskeletal Diseases. Arthritis Rheumatol.
3 Russell MD, Dey M, Flint J, et al. (2023). British Society for Rheumatology guideline on prescribing drugs in pregnancy and breastfeeding: Immunomodulatory anti-rheumatic drugs and corticosteroids. Rheumatology (Oxford).

## Substance Identification

### Substance Name

Leflunomide

### CAS Registry Number

75706-12-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antirheumatic Agents

Immunosuppressive Agents